# Benzonatate

CASRN: 104-31-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of benzonatate during breastfeeding. If a mother requires benzonatate, it is not a reason to discontinue breastfeeding; however, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Dextromethorphan

## Substance Identification

### Substance Name

Benzonatate

### CAS Registry Number

104-31-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antitussive Agents